# Albendazole

CASRN: 54965-21-8

## Drug Levels and Effects

### Summary of Use during Lactation

Albendazole and its active metabolite are minimally excreted into breastmilk. An informal consultation group to the World Health Organization concluded that a single oral dose of albendazole can be given to lactating women.[1]

### Drug Levels

Albendazole is poorly absorbed orally and is extensively metabolized to the active metabolite albendazole sulfoxide via extensive first-pass metabolism by CYP3A4. It is further metabolized to the inactive metabolite, albendazole sulfone.

Maternal Levels. Thirty-three women who were breastfeeding infants between 2 weeks and 6 months of age were given a single dose of albendazole 400 mg orally. Milk samples were obtained before the dose and 6, 12, 24 and 36 h after drug administration. Maternal blood samples were obtained 6 hours after drug administration. Albendazole, albendazole sulfoxide, and albendazole sulfone were measured in maternal blood and milk samples. Pharmacokinetic parameters for albendazole sulfoxide were calculated using data from 20 of the women who provided 3 or more milk samples. The mean peak milk concentration was 352 mcg/L which occurred at a mean of 6.9 hours. It had a half-life in breastmilk of 12.4 hours. Albendazole sulfoxide concentration 36 hours after the dose averaged 57 mcg/L; both albendazole and albendazole sulfone were undetectable (<661 mcg/L) in milk at this time. The authors estimated that a fully breastfed infant would be exposed to less than 0.1 mg/kg of albendazole sulfoxide over a 36-hour period following a maternal dose of 400 mg and even less of albendazole.[2] This translates into an infant dosage of less than 1.5% of the weight-adjusted maternal dosage.

A pharmacokinetic model was constructed to estimate the amount of albendazole and its sulfoxide metabolite in milk to both. Using the peak predicted milk levels of both, the estimated infant dose was 0.011 mg/kg daily, which equates to 0.6% of the adult dose for albendazole.[3]

Infant Levels. No measurements of albendazole serum concentrations in breastfed infants have been found as of the revision date. A pharmacokinetic model was constructed to estimate the infant exposure of albendazole and its sulfoxide metabolite. Infant plasma concentrations for albendazole were estimated to be at least 100-fold lower than those seen in adults at the recommended dose.[3]

### Effects in Breastfed Infants

Two mothers with intestinal parasites were given a single 400 mg oral dose of albendazole while exclusively breastfeeding their infants who were between 1 and 6 months of age. No mention was made of adverse reactions in the breastfed infants.[4]

### Effects on Lactation and Breastmilk

A study compared mothers in Peru who were given either a single dose of albendazole 400 mg (n = 117) or matching placebo (n = 99). Infant breastmilk intake was measured at 1 and 6 months postpartum. At 1 month postpartum, 92.5% of subjects were exclusively or predominantly breastfeeding. Daily infant milk intake was 756 mL in the albendazole group and 774 mL in the placebo group, which was not statistically different. A 6 months of age, only 10% of each group was exclusively or predominantly breastfeeding. Their infants’ milk intakes were not statistically different.[5]

### Alternate Drugs to Consider

Mebendazole

### References

1 Allen H, Crompton D, de Silva N, et al. New policies for using anthelmintics in high risk groups. Trends Parasitol 2002;18:381-2.12377247
2 Abdel-tawab A, Bradley M, Ghazaly E, et al. Albendazole and its metabolites in the breast milk of lactating women following a single oral dose of albendazole. Br J Clin Pharmacol 2009;68:737-42.19916998
3 Cole S, Malamatari M, Butler A, et al. Investigation of a fully mechanistic physiologically based pharmacokinetics model of absorption to support predictions of milk concentrations in breastfeeding women and the exposure of infants: A case study for albendazole. CPT Pharmacometrics Syst Pharmacol 2024;13:1990-2001.39558864
4 Dhonukshe-Rutten R, Vossenaar M, West C, et al. Day-to-day variations in iron, zinc and copper in breast milk of Guatemalan mothers. J Pediatr Gastroenterol Nutr 2005;40:128-34.15699684
5 Mofid L, Casapía M, Montresor A, et al. Maternal postpartum deworming and infant milk intake: Secondary outcomes from a trial. Matern Child Nutr 2021;17:e13183.33729674

## Substance Identification

### Substance Name

Albendazole

### CAS Registry Number

54965-21-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anticestodal Agents

Antiparasitic Agents

Antiprotozoal Agents